# Escitalopram

CASRN: 128196-01-0

## Drug Levels and Effects

### Summary of Use during Lactation

Escitalopram is the active S-isomer of the antidepressant, citalopram. Limited information indicates that maternal doses of escitalopram up to 20 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. No adverse effects on development have been found in infants followed for up to 5 years of age. If the mother requires escitalopram, it is not a reason to discontinue breastfeeding. A safety scoring system finds escitalopram use to be possible during breastfeeding.[1] Monitor the infant for excess drowsiness, restlessness, agitation, poor feeding and poor weight gain, especially in younger, exclusively breastfed infants and when using combinations of psychotropic drugs.

Mothers taking an SSRI during pregnancy and postpartum may have more difficulty breastfeeding, although this might be a reflection of their disease state.[2] These mothers may need additional breastfeeding support. Breastfed infants exposed to an SSRI during the third trimester of pregnancy are at risk for neonatal withdrawal syndrome consisting of hypoglycemia, tremors, tachycardia, or hypotonia, and might be at a greater risk of readmission due to jaundice.[3,4]

### Drug Levels

Escitalopram is the S-isomer of racemic citalopram which is metabolized to 2 metabolites, each having antidepressant activity considered to be about 13% that of citalopram.[5]

Maternal Levels. Eight women taking escitalopram in an average dosage of 199 mcg/kg daily (10 to 20 mg daily) had 6 to 8 milk steady-state milk samples analyzed over the 24-hour interval after their single daily dose. The average dosage that an exclusively breastfed infant would receive was calculated to be 7.6 mcg/kg of escitalopram and 3 mcg/kg of desmethylcitalopram daily which were 3.9% and 1.7% of the maternal weight-adjusted dosages, respectively. The absolute dosage was about 40% less than a previous study by the same authors with racemic citalopram.[6]

A woman taking escitalopram had milk escitalopram concentrations measured twice. While taking a dosage of 5 mg daily, milk escitalopram was 24.9 mcg/L at 20 hours after the dose. While taking 10 mg escitalopram daily and valproic acid 1200 mg daily, milk escitalopram was 76.1 mcg/L at 15 hours after the dose. Using these two data points, the authors estimated that the infant received 5.1% and 7.7% of the maternal weight-adjusted dosage of escitalopram on these days, respectively.[7]

One woman was taking escitalopram 20 mg daily and reboxetine 4 mg daily orally while nursing her 9.5-month-old infant. She collected milk samples before each breastfeeding session over a 1-day period. The authors estimated that the infant would receive 4.6% of the maternal-weight-adjusted dosage of escitalopram plus desmethylescitalopram.[8]

A nursing mother was taking escitalopram 20 mg daily. Foremilk and hindmilk samples taken at 1 week postpartum, 12 hours after a dose contained 173 mcg/L and 195 mcg/L, respectively. The samples also contained 21 mcg/L and 24 mcg/L of S -desmethylcitalopram in foremilk and hindmilk, respectively.[9]

Eighteen lactating women taking escitalopram in a mean daily dosage of 10 mg (range 2.5 to 30 mg [mean 0.2 mg/kg daily]) donated 3 to 5 random milk samples over a 24-hour period (n = 104 samples). The mean peak milk levels were 84.3 and 84.7 mcg/L for the 10 and 20 mg daily doses, respectively. Women taking 30 mg daily had an average peak milk level of 202 mcg/L. The average milk levels were 32.9 mcg/L with a dose of 10 mg daily, 49.8 mcg/L with a 20 mg dose and 136 mcg/L with 30 mg daily. Hindmilk concentrations averaged 10% higher than foremilk values. With a dose of 20 mg daily, the infant dosage was calculated to be 0.0078 mg/kg daily or 2.6% of the weight-adjusted maternal dosage.[10]

Nursing women taking either citalopram or escitalopram provided foremilk and hindmilk samples once during the first week postpartum (n = 29) and again at 1 month postpartum (n = 23) for a total of 104 milk samples. These samples together with paired blood samples were used to create a population pharmacokinetic model of escitalopram excretion into breastmilk using NONMEM. Genomic testing was also performed on blood samples and milk content was analyzed. With a maternal dose of 10 mg daily, the final model predicted that an exclusively breastfed infant would receive a median of 0.005 mg/kg daily (range: 0.001 to 0.016 mg/kg daily), which corresponds to median weight-adjusted dosage of 3.3%; (range 0.8% to 11.3%). The relative infant dosage would be 5.5% for infants whose mothers are CYP2C19 poor metabolizers compared to 3% in other phenotypes. The active metabolite did not contribute markedly to overall infant exposure.[11] The measurement of fat content in the study may not have been accurate.[12]

Four patients were treated with escitalopram 1.5 to 15 mg daily. Three patients had milk concentrations ranging from 1.1 to 100 mcg/L. The fourth patient, who was treated with 5 mg daily had a milk concentration of 33.3 mcg/L. Collection times of the samples were not reported.[13]

A physiologically based pharmacokinetic model was developed for escitalopram. The model predicted observed milk levels fairly well. Milk pH did not affect excretion into milk and the model predicted a relative infant dose of 3.98%.[14]

Infant Levels. One study found that racemic citalopram serum levels in infants were determined by their CYP2C19 genotype, with slow metabolizers more likely to have detectable serum levels.[15] Pharmacogenetics likely plays a part in determining the exposure of breastfed infants to escitalopram also.

In 8 breastfed infants whose mothers were taking an average of 199 mcg/kg daily of escitalopram (10 or 20 mg daily), escitalopram and desmethylescitalopram were undetectable in the serum of 3 infants (<1 mcg/L). The drug and metabolite serum levels were less than 5 mcg/L in all the other infants. Their mothers’ serum levels of the drug and metabolite averaged 24 and 20 mcg/L, respectively.[6]

Eighteen lactating women taking escitalopram in a mean daily dosage of 10 mg (range 2.5 to 30 mg [mean 0.2 mg/kg daily]) donated 3 to 5 random milk samples over a 24-hour period (n = 104 samples). The data were used to construct a physiologically based pharmacokinetic model simulating 1600 infant serum levels whose mothers received a dose of 20 mg daily. The predicted average infant serum concentrations were 1.7% (range, 0.5 to 5.9%) of the average maternal serum concentrations. Age of the infant from birth to 1 year did not substantially impact the results.[10]

### Effects in Breastfed Infants

Eight breastfed infants whose mothers were taking escitalopram in an average dose of 199 mcg/kg daily for postpartum depression were evaluated by a pediatric specialist using the Denver developmental scale. Their mothers had taken escitalopram for a median of 55 days postpartum (range 23 to 240 days). The infants’ scores on this scale was 110% of normal.[6]

A woman began taking escitalopram 5 mg daily immediately after birth. Her dosage was increased to 10 mg daily and valproic acid 1200 mg daily was added by 7 weeks postpartum. Her breastfed infant was judged to be healthy and have normal neuropsychological development by a general practitioner at 7.5 weeks of age.[7]

One woman was taking escitalopram 20 mg daily and reboxetine 4 mg daily orally while nursing her infant (extent not stated). She had taken reboxetine for 1.5 months, but the start of her escitalopram therapy was not stated. At 9.5 months of age, her breastfed infant had normal weight gain and a Denver developmental score of 105% of chronological age.[8]

A nursing mother was given escitalopram 10 mg daily for depression beginning at 3 weeks postpartum and increasing to 20 mg daily thereafter. At 4 months of age, her exclusively breastfed infant was admitted to the hospital for irritability, vomiting and fever of 4 days duration. He had been irritable with prolonged periods of crying for the past 3 months according to his mother and had gained only 400 grams per month since birth. Liver enzymes were moderately elevated. The infant was discharged after 5 days and breastfeeding was continued, but only twice daily for 2 weeks, then discontinued at 4.5 months of age. At 5 months, symptom improvement was noted and at 6 months, serum liver enzymes had normalized. The author noted that the time course of the adverse effects were consistent with the treatment with escitalopram.[16]

A mother began taking escitalopram 20 mg daily in the morning on day 15 postpartum. She exclusively breastfed her infant on demand. At 3 months of age, no adverse effects had been reported in the infant by his pediatrician.[17]

At 5 days of age, an infant was readmitted to the neonatal intensive care unit with a diagnosis of necrotizing enterocolitis. The infant had spent the first 2 days of life in intensive care because of respiratory distress. The infant’s mother had taken escitalopram 20 mg daily throughout pregnancy and while breastfeeding (extent not stated). The authors hypothesized that escitalopram might have been responsible for the enterocolitis because of its effect on platelet aggregation.[18] The drug was possibly a cause of the reaction.

One author reported on the newborn infant of a mother who was taking escitalopram (dose and duration not stated). The hyperirritable infant had high-pitched crying 2 hours after breastfeeding every afternoon which was 5 to 6 hours after maternal dose of escitalopram. Changing the time of the mother’s escitalopram dose resulted in a shift in the time of the infant’s crying at the same time interval after the dose. The infant’s symptoms improved with partial substitution of formula and ceased on day 11 of life with complete formula feeding.[19]

An uncontrolled online survey compiled data on 930 mothers who nursed their infants while taking an antidepressant. Infant drug discontinuation symptoms (e.g., irritability, low body temperature, uncontrollable crying, eating and sleeping disorders) were reported in about 10% of infants. Mothers who took antidepressants only during breastfeeding were much less likely to notice symptoms of drug discontinuation in their infants than those who took the drug in pregnancy and lactation.[20]

A 6.5-month-old infant developed severe vomiting and an apparent tonic seizure after being breastfed by her mother. The mother had been taking escitalopram 10 mg daily since birth and had begun extended-release bupropion 150 mg daily 3 weeks earlier. The seizure occurred 8 hours after the mother’s morning dose of bupropion. The infant’s mother had noted disturbances in sleep behavior, unusual movements, and unresponsiveness followed by sleep on several previous occasions. The baby was partially breastfed, also receiving pumped breastmilk, formula, and solid foods. Breastfeeding was discontinued and the baby was discharged after being asymptomatic for 48 hours. The seizure was probably drug-related, most likely caused by bupropion and hydroxybupropion in breastmilk, but a contribution by escitalopram cannot be ruled out.[21]

A cohort of 247 infants exposed to an antidepressant in utero during the third trimester of pregnancy were assessed for poor neonatal adaptation (PNA). Of the 247 infants, 154 developed PNA. Infants who were exclusively given formula had about 3 times the risk of developing PNA as those who were exclusively or partially breastfed. None of the infants were exposed to escitalopram in utero, but 51 were exposed to citalopram, the racemic form of the drug.[22]

A case-control study in Israel compared 280 infants of nursing mothers taking long-term psychotropic drugs to the infants of 152 women taking antibiotics. Infant sleepiness at 3 days of age was reported by 3 mothers taking escitalopram during pregnancy and breastfeeding and by none taking antibiotics. The sleepiness resolved within 24 hours with no developmental effect.[23]

A mother with mixed anxiety-depressive order was taking sertraline and breastfeeding her 9-month-old infant. Because of side effects, sertraline was stopped and citalopram 10 daily was started. After 2 weeks of therapy, she reported signs of bruxism in her infant who was breastfed 5 to 6 times daily, as well as supplementary feedings such as fruits, vegetables, meat, and biscuits. The infant had sporadic, pulsatile, and momentary movements in her jaws, which usually began with movements of the head, especially during sleep. Furthermore, the mother mentioned her child had a habit of biting and clenching her teeth while awake. Pediatric and dental examinations found no abnormalities, but the dentist observed bruxism during the examination. Citalopram was discontinued and bruxism symptoms resolved after 72 hours. The mother resumed breastfeeding with no return of symptoms, and the infant had no bruxism symptoms for the next 2 years.[20] Bruxism was probably caused by citalopram in breastmilk.

In a retrospective cohort study of 5,079 newborns whose mothers took an SSRI during pregnancy, 1.5% of breastfed newborns had neonatal withdrawal compared with 2.3% among the formula-fed newborns, although this did not reach statistical significance. Breastfed newborns had a reduced risk of transfer to the NICU than formula-fed newborns; however, this finding did not persist in sensitivity analysis. Thirty-seven percent of women in the study were taking escitalopram.[24] A further analysis of these data indicated that infants of mothers who took a SSRI during pregnancy and exclusively breastfed had a greater risk of an emergency department visit or readmission to the hospital, primarily due to jaundice.[4]

A secondary analysis of a population study evaluated infant IQ scores with SSRI use postpartum during nursing (n = 22), non-SSRI exposed breastfed infants (n = 37), and non-breastfed infants (n = 38). Of the entire group of mothers, 81 mothers were treated with fluoxetine, 9 with sertraline, 8 with paroxetine, and 2 with citalopram. Children had IQ testing at a mean age of 4.9 years. There were no significant differences in any adjusted mean IQ scores between breastfed children with and without postnatal SSRI exposure.[25]

A pilot study compared the stool of breastfed infants whose mothers were taking an SSRI antidepressant to those of infants whose mothers were not taking an SSRI. One of the 10 women taking an SSRI was taking escitalopram. The stools of infants exposed to an SSRI in milk had increases in the genera Gemella, Staphylococcus and Corynebacterium and a decrease in Lactobacillus.[26]

### Effects on Lactation and Breastmilk

The SSRI class of drugs, including escitalopram, can cause increased prolactin levels and galactorrhea in nonpregnant, nonbreastfeeding patients.[27-37] Euprolactinemic galactorrhea has also been reported.[38-40] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a small prospective study, 8 primiparous women who were taking a serotonin reuptake inhibitor (SRI; 3 taking fluoxetine and 1 each taking citalopram, duloxetine, escitalopram, paroxetine or sertraline) were compared to 423 mothers who were not taking an SRI. Mothers taking an SRI had an onset of milk secretory activation (lactogenesis II) that was delayed by an average of 16.7 hours compared to controls (85.8 hours postpartum in the SRI-treated mothers and 69.1 h in the untreated mothers), which doubled the risk of delayed feeding behavior in the untreated group. However, the delay in lactogenesis II may not be clinically important, since there was no statistically significant difference between the groups in the percentage of mothers experiencing feeding difficulties after day 4 postpartum.[41]

A case control study compared the rate of predominant breastfeeding at 2 weeks postpartum in mothers who took an SSRI antidepressant throughout pregnancy and at delivery (n = 167) or an SSRI during pregnancy only (n = 117) to a control group of mothers who took no antidepressants (n = 182). Among the two groups who had taken an SSRI, 33 took citalopram, 18 took escitalopram, 63 took fluoxetine, 2 took fluvoxamine, 78 took paroxetine, and 87 took sertraline. Among the women who took an SSRI, the breastfeeding rate at 2 weeks postpartum was 27% to 33% lower than mother who did not take antidepressants, with no statistical difference in breastfeeding rates between the SSRI-exposed groups.[42]

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[43] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[44] None of the mothers were taking escitalopram.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[45]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
2 Grzeskowiak LE, Leggett C, Costi L, . Impact of serotonin reuptake inhibitor use on breast milk supply in mothers of preterm infants: A retrospective cohort study. Br J Clin Pharmacol 2018;84:1373-9.29522259
3 Wang J, Cosci F. Neonatal withdrawal syndrome following late in utero exposure to selective serotonin reuptake inhibitors: A systematic review and meta-analysis of observational studies. Psychother Psychosom 2021;90:299-307.33971648
4 Cantin C, Li W, Snelgrove-Clarke E, . Examining the effect of newborn feeding method on postnatal length of stay and healthcare utilisation among Neonates With In-utero SSRI Exposure (NeoWISE): a retrospective cohort study. BMJ Paediatr Open 2026;10
5 Weissman AM, Levy BT, Hartz AJ, . Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
6 Rampono J, Hackett LP, Kristensen JH, . Transfer of escitalopram and its metabolite demethylescitalopram into breastmilk. Br J Clin Pharmacol 2006;62:316-22.16934048
7 Castberg I, Spigset O. Excretion of escitalopram in breast milk. J Clin Psychopharmacol 2006;26:536-8.16974204
8 Hackett LP, Ilett KF, Rampono J, . Transfer of reboxetine into breastmilk, its plasma concentrations and lack of adverse effects in the breastfed infant. Eur J Clin Pharmacol 2006;62:633-8.16699799
9 Weisskopf E, Panchaud A, Nguyen KA, . Simultaneous determination of selective serotonin reuptake inhibitors and their main metabolites in human breast milk by liquid chromatography-electrospray mass spectrometry. J Chromatogr B Analyt Technol Biomed Life Sci 2017;1057:101-9.
10 Delaney SR, Malik PRV, Stefan C, . Predicting escitalopram exposure to breastfeeding infants: Integrating analytical and in silico techniques. Clin Pharmacokinet 2018;57:1603-11.29651785
11 Weisskopf E, Guidi M, Fischer CJ, . A population pharmacokinetic model for escitalopram and its major metabolite in depressive patients during the perinatal period: Prediction of infant drug exposure through breast milk. Br J Clin Pharmacol 2020;86:1642-53.32162723
12 Krutsch K. Manufacturer-documented infrared interference from SSRIs: A confound in breast milk fat and pharmacokinetic studies re: (1) Monfort A., et al. Br J Clin Pharmacol. 2024;90(11):2849-2860. (2) Weisskopf E, et al. Br J Clin Pharmacol. 2020;86:1642-1653. Br J Clin Pharmacol 2026;92:2423-4.39030897
13 Le Marois M, Doudka N, Tzavara E, . Simultaneous quantification of psychotropic drugs in human plasma and breast milk and its application in therapeutic drug monitoring and peripartum treatment optimization. Ther Drug Monit 2024;46:227-36.37684719
14 Kayesh R, Pressly M, Guinn D, . Application of lactation physiologically based pharmacokinetic modeling to predict milk exposure of passively diffused drugs. J Clin Pharmacol 2025;65:1637-49.40853187
15 Berle JØ, Steen VM, Aamo TO, . Breastfeeding during maternal antidepressant treatment with serotonin reuptake inhibitors: Infant exposure, clinical symptoms, and cytochrome P450 genotypes. J Clin Psychiatry 2004;65:1228-34.15367050
16 Merlob P. Use of escitalopram during lactation. BELTIS Newsl 2005;Number 13:40-4.
17 Gentile S. Escitalopram late in pregnancy and while breast-feeding. Ann Pharmacother 2006;40:1696-7.16912243
18 Potts AL, Young KL, Carter BS, . Necrotizing enterocolitis associated with in utero and breast milk exposure to the selective serotonin reuptake inhibitor, escitalopram. J Perinatol 2007;27:120-2.17262045
19 Schaefer C, Peters P, Miller RK. Drugs during pregnancy and lactation: Treatment options and risk assessment, 3rd ed. Boston: Academic Press; 2015.
20 Hale TW, Kendall-Tackett K, Cong Z, . Discontinuation syndrome in newborns whose mothers took antidepressants while pregnant or breastfeeding. Breastfeed Med 2010;5:283-8.20807106
21 Neuman G, Colantonio D, Delaney S, . Bupropion and escitalopram during lactation. Ann Pharmacother 2014;48:928-31.24732787
22 Kieviet N, Hoppenbrouwers C, Dolman KM, . Risk factors for poor neonatal adaptation after exposure to antidepressants in utero. Acta Paediatr 2015;104:384-91.25559357
23 Kronenfeld N, Ziv Baran, T, Berlin M, . Chronic use of psychotropic medications in breastfeeding women: Is it safe? PLoS One 2018;13:e0197196.29782546
24 Cantin C, Li W, Snelgrove-Clarke E, . Neonates With In-Utero SSRI Exposure (NeoWISE): A retrospective cohort study examining the effect of newborn feeding method on newborn withdrawal. Int J Popul Data Sci 2024;9:2458.39679336
25 Heinonen EW, Kao K, Mattson SN, . Cognitive outcomes of children exposed to selective serotonin reuptake inhibitors through breast milk. JAMA Netw Open 2025;8:e2544989.41269692
26 Desorcy-Scherer K, McNamara K, Luellwitz R, . Early insights into maternal antidepressant use and the human infant gut microbiome. Biol Res Nurs 2026;28:406-17.41652998
27 Arya DK, Taylor WS. Lactation associated with fluoxetine treatment. Aust N Z J Psychiatry 1995;29:697.8825840
28 Egberts AC, Meyboom RH, De Koning FH, . Non-puerperal lactation associated with antidepressant drug use. Br J Clin Pharmacol 1997;44:277-81.9296322
29 Iancu I, Ratzoni G, Weitzman A, . More fluoxetine experience. J Am Acad Child Adolesc Psychiatry 1992;31:755-6.1644743
30 González Pablos E, Minguez MartÍn L, Hernández Fernández M, . A clinical case of galactorrhoea after citalopram treatment. Actas Esp Psiquiatr 2001;29:414.11730581
31 Gulsun M, Algul A, Semiz UB, . A case with euprolactinemic galactorrhea induced by escitalopram. Int J Psychiatry Med 2007;37:275-8.18314855
32 Aggarwal A, Kumar R, Sharma RC, . Escitalopram induced galactorrhoea: A case report. Prog Neuropsychopharmacol Biol Psychiatry 2010;34:557-8.20138200
33 Shim SH, Lee YJ, Lee EC. A case of galactorrhea associated with excitalopram (sic). Psychiatry Investig 2009;6:230-2.
34 Suthar N, Pareek V, Nebhinani N, . Galactorrhea with antidepressants: A case series. Indian J Psychiatry 2018;60:145-6.29736080
35 Pathania M, Goel B, Dhamija P, . A rare adverse drug reaction to escitalopram. J Family Med Prim Care 2018;7:466-7.30090797
36 McGrane IR, Morefield CM, Aytes KL. Probable galactorrhea associated with sequential trials of escitalopram and duloxetine in an adolescent female. J Child Adolesc Psychopharmacol 2019;29:788-9.31339744
37 Ozkan HM. Galactorrhea and hyperprolactinemia during vortioxetine use: Case report. Turk Biyokim Derg 2019;44:105-7. doi:10.1515/tjb-2018-0106
38 Mahasuar R, Majhi P, Ravan JR. Euprolactinemic galactorrhea associated with use of imipramine and escitalopram in a postmenopausal woman. Gen Hosp Psychiatry 2010;32:341.e11-3.
39 Praharaj SK. Euprolactinemic galactorrhea with escitalopram. J Neuropsychiatry Clin Neurosci 2014;26:E25-6.
40 Kaba D, Oner O. Galactorrhea after selective serotonin reuptake inhibitor use in an adolescent girl: A case report. J Clin Psychopharmacol 2017;37:374-6.
41 Marshall AM, Nommsen-Rivers LA, Hernandez LL, . Serotonin transport and metabolism in the mammary gland modulates secretory activation and involution. J Clin Endocrinol Metab 2010;95:837-46.19965920
42 Gorman JR, Kao K, Chambers CD. Breastfeeding among women exposed to antidepressants during pregnancy. J Hum Lact 2012;28:181-8.22344850
43 Venkatesh KK, Castro VM, Perlis RH, . Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
44 Leggett C, Costi L, Morrison JL, . Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
45 Grzeskowiak LE, Saha MR, Nordeng H, . Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Escitalopram

### CAS Registry Number

128196-01-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Serotonin Uptake Inhibitors

Antidepressive Agents, Second-Generation